# Rupatadine

CASRN: 158876-82-5

## Drug Levels and Effects

### Summary of Use during Lactation

Information from two mother taking rupatadine found no adverse effects in their breastfed infants. Because little information is available on the use of rupatadine during breastfeeding, an alternate drug may be preferred, especially while nursing a newborn or preterm infant. If it is used in a nursing mother, monitor the infant for sedation, poor feeding and poor weight gain.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Two infants were breastfed during maternal rupatadine use. One mother was taking rupatadine 10 mg daily as well as bupropion, mirtazapine and sertraline. She exclusively breastfed her infant for 3 months. At 16 months of age, the infant had age-appropriate weight gain, normal sleeping and appetite, normal development. The second mother was taking 20 mg daily (twice the recommended dose). Her milk production decreased and the dose was decreased to 10 mg daily, but the infant was only about 50% breastfed until 2 months of age when breastfeeding was stopped. No adverse effects occurred in the infant, and the infant had age-appropriate weight gain, normal sleeping and appetite, normal development were noted at 4 months of age.[1]

### Effects on Lactation and Breastmilk

One mother was taking 20 mg of rupatadine daily (twice the recommended dose). Her milk production decreased so that the infant was only about 50% breastfed. The dose was decreased to 10 mg daily, but the milk continued to decline until 2 months of age when breastfeeding was stopped.[1] It is not clear if the decline in milk production was caused by rupatadine.

### Alternate Drugs to Consider

Cetirizine, Desloratadine, Fexofenadine, Levocetirizine, Loratadine

### References

1 Shalit S, Yehuda S, De-Haan T, et al. Rupatadine during breastfeeding: Two case reports. Neurotoxicol Teratol 2025;109 (Suppl 2):26.doi:10.1016/j.ntt.2025.107515

## Substance Identification

### Substance Name

Rupatadine

### CAS Registry Number

158876-82-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antihistamines

Nonsedating Antihistamines

Histamine Antagonists

Platelet Activating Factor Antagonists